# Dextroamphetamine

CASRN: 51-64-9

## Drug Levels and Effects

### Summary of Use during Lactation

In dosages prescribed for medical indications, some evidence indicates that dextroamphetamine might not affect nursing infants adversely. The effect of dextroamphetamine in milk on the neurological development of the infant has not been well studied. It is possible that large dosages of dextroamphetamine might interfere with milk production, especially in women whose lactation is not well established. Although most manufacturers advise that mothers not breastfeed while taking amphetamine, some experts state that therapeutic dosages of amphetamine can be used during nursing with monitoring of the infant for irritability, insomnia, and feeding difficulty.[1] Breastfeeding is generally discouraged in mothers who are actively abusing amphetamines.[2–4]

### Drug Levels

Maternal Levels. Four mothers averaging 5.5 months postpartum (range 3.3 to 10 months) were taking dextroamphetamine in an average dosage of 18 mg daily (range 15 to 45 mg daily in 2 to 4 divided doses) for attention deficit hyperactivity disorder. The median milk level was 219 mcg/L (range 66 to 313 mcg/L) which resulted in an infant dosage of 21 mcg/kg (range 11 to 39 mcg/kg) daily or 5.7% (range 4 to 10.6%) of the maternal weight-adjusted dosage.[5]

Infant Levels. Dextroamphetamine blood levels were measured in 3 breastfed infants. The mothers of these 3 infants were taking an average of 392 mcg/kg daily of dextroamphetamine. Blood levels in 2 infants were 2 and 18 mcg/L, corresponding to 6 and 14% of the maternal plasma level. The plasma level of the third infant was <1 mcg/L. The times of blood collection were not stated.[5]

### Effects in Breastfed Infants

The author of a 1973 newsletter reported a personal communication from the drug manufacturer which stated that of 103 nursing mothers treated with dextroamphetamine (dosage unspecified) for postpartum depression, no infant showed any evidence of stimulation or insomnia.[6]

Four mothers averaging 5.5 months postpartum (range 3.3 to 10 months) were taking dextroamphetamine in an average dosage of 18 mg daily (range 15 to 45 mg daily in 2 to 4 divided doses) for attention deficit hyperactivity disorder. Their infants had been breastfed (extent not stated) since birth. The infants all had weights between the 10th and 75th percentiles for their age, normal progress, and no adverse effects according to their pediatricians. Denver developmental ages for 2 of the infants were 100% and 117% of normal.[5]

In a prospective study, lactating women taking either lisdexamfetamine (Vyvanse®, Shire; n = 6) or mixed racemic amphetamine salts (n = 7) for attention deficit hyperactivity disorder were followed by telephone for several months to 5 years. Seven had also taken one of the drugs during pregnancy. At an average age of follow-up of 18 months, 5 of their 13 infants (5 fully breastfed) had experienced an adverse reaction possibly related to amphetamine in milk; 1 infant had somnolence, 3 had crying or restlessness, and 4 had colic or constipation. Four of these 5 were only partially breastfed from birth onward. All infants had normal Denver developmental scale and pediatric quality of life scores. The authors concluded that therapeutic used of amphetamines is likely compatible with breastfeeding.[7]

### Effects on Lactation and Breastmilk

In 2 papers by the same authors, 20 women with normal physiologic hyperprolactinemia were studied on days 2 or 3 postpartum. Eight received dextroamphetamine 7.5 mg intravenously, 6 received 15 mg intravenously and 6 who served as controls received intravenous saline. The 7.5 mg dose reduced serum prolactin by 25 to 32% compared to control, but the difference was not statistically significant. The 15 mg dose significantly decreased serum prolactin by 30 to 37% at times after the infusion. No assessment of milk production was presented.[8,9] The authors also quoted data from another study showing that a 20 mg oral dose of dextroamphetamine produced a sustained suppression of serum prolactin by 40% in postpartum women. The maternal prolactin level in a mother with established lactation may not affect her ability to breastfeed.

In a retrospective Australian study, mothers who used intravenous amphetamines during pregnancy were less likely to be breastfeeding their newborn infants at discharge than mothers who abused other drugs (27% vs 42%). The cause of this difference was not determined.[10]

### Alternate Drugs to Consider

(ADHD) Amphetamine, Lisdexamfetamine, Methylphenidate; (Narcolepsy) Amphetamine, Armodafinil, Lisdexamfetamine, Methylphenidate, Modafinil, Oxybate Salts, Pitolisant

### References

1 Scoten O, Tabi K, Paquette V, . Attention-deficit/hyperactivity disorder in pregnancy and the postpartum period. Am J Obstet Gynecol 2024;231:19–35 38432409
2 Oei JL, Kingsbury A, Dhawan A, . Amphetamines, the pregnant woman and her children: A review. J Perinatol 2012;32:737–47 22652562
3 AAP Section on Breastfeeding. Breastfeeding and the use of human milk. Pediatrics 2012;129:e827–41 22371471
4 Wong S, Ordean A, Kahan M. SOGC clinical practice guidelines: Substance use in pregnancy: No. 256, April 2011. Int J Gynaecol Obstet 2011;114:190–202 21870360
5 Ilett KF, Hackett LP, Kristensen JH, . Transfer of dexamphetamine into breast milk during treatment for attention deficit hyperactivity disorder. Br J Clin Pharmacol 2007;63:371–5 17380592
6 Ayd FJ. Excretion of psychotropic drugs in human breast milk. Int Drug Ther Newsl 1973;8:33–40
7 Benassayag Kaduri N, Hazan A, De-Haan T, . Amphetamine use for attention deficit hyperactive disorder during breastfeeding and children’s neurodevelopmental outcomes: A pilot study. Psychiatry Res 2024;339:116047 38908263
8 DeLeo V, Cella SG, Camanni F, . Prolactin lowering effect of amphetamine in normoprolactinemic subjects and in physiological and pathological hyperprolactinemia. Horm Metab Res 1983;15:439–43 6642414
9 Petraglia F, De Leo V, Sardelli S, . Prolactin changes after administration of agonist and antagonist dopaminergic drugs in puerperal women. Gynecol Obstet Invest 1987;23:103–9 3583091
10 Oei J, Abdel-Latif ME, Clark R, . Short-term outcomes of mothers and infants exposed to antenatal amphetamines. Arch Dis Child Fetal Neonatal Ed 2010;95:F36–F41 19679891

## Substance Identification

### Substance Name

Dextroamphetamine

### CAS Registry Number

51-64-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Adrenergic Agents

Central Nervous System Stimulants

Dopamine Agents

Sympathomimetics

Wakefulness-Promoting Agents